# Mianserin

CASRN: 24219-97-4

## Drug Levels and Effects

### Summary of Use during Lactation

Mianserin is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Limited information indicates that maternal doses up to 60 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Until more data are available, mianserin should be used with careful monitoring during breastfeeding.

### Drug Levels

Maternal Levels. One woman with major depression was taking mianserin 60 mg daily for 9 days. Another woman was taking mianserin 40 mg daily for 14 days. A single milk sample was collected 15 hours after the previous dose in each woman. The first woman had breastmilk levels of 80 mcg/L of mianserin and 10 mcg/L of desmethylmianserin. The second woman had breastmilk levels of 20 mcg/L of mianserin and 20 mcg/L of desmethylmianserin. The authors estimated that the daily dosages were 0.012 mg/kg for the first infant, and 0.003 mg/kg for the second. These correspond to 1.4% and 0.5% of their respective mothers' weight-adjusted maternal dosages.[1]

Infant Levels. One woman with major depression was taking mianserin 60 mg daily for 9 days. Her 3-month-old breastfed (extent not stated) infant's plasma had no detectable (<10 mcg/L) mianserin or desmethylmianserin. Another 5-month-old breastfed (extent not stated) infant whose mother was taking mianserin 40 mg daily for 14 days had mianserin 12 mcg/L and desmethylmianserin 14 mcg/L detected in his urine.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[2] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[3] None of the mothers were taking mianserin.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[4]

### References

1 Buist A, Norman TR, Dennerstein L. Mianserin in breast milk. Br J Clin Pharmacol 1993;36:133-4.8398582
2 Venkatesh KK, Castro VM, Perlis RH, et al. Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
3 Leggett C, Costi L, Morrison JL, et al. Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
4 Grzeskowiak LE, Saha MR, Nordeng H, et al. Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Mianserin

### CAS Registry Number

24219-97-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Second-Generation

Serotonin Antagonists